# Moclobemide

CASRN: 71320-77-9

## Drug Levels and Effects

### Summary of Use during Lactation

Moclobemide is not approved for marketing in the United States by the U.S. Food and Drug Administration, but is available in other countries. Limited information indicates that maternal doses of moclobemide up to 900 mg daily produce low levels in milk. Although several breastfed infants apparently experienced no adverse effects during maternal use of moclobemide, no rigorous, long-term data are available. Until more data are available, moclobemide should only be used with careful monitoring during breastfeeding, especially while nursing a newborn or preterm infant.

### Drug Levels

Maternal Levels. Six mothers who were 3 to 5 days postpartum were given a single dose of 300 mg of moclobemide by mouth. Milk samples were taken before the dose and 3, 6, 9, 12 and 24 hours after the dose. Peak milk levels of moclobemide and its major inactive metabolite, Ro 12-8095, occurred 3 hours after the dose. The average 24-hour excretion of moclobemide in milk was 0.17 mg (range 0.11 to 0.28 mg) and of Ro 12-8095 was 0.1 mg (range 0.05 to 0.14 mg). The active metabolite, Ro 12-5637, was not detectable (assay limit not stated) in breastmilk. The authors estimated that this amount would be equal to approximately 1% of the weight-adjusted maternal dosage.[1]

Eight women were being treated for postpartum depression with moclobemide in daily dosages ranging from 300 mg to 900 mg. After at least 2 weeks of therapy, single blood and milk samples were collected from each patient within 4 hours after the dose. Average breastmilk levels were as follows: 300 mg daily (n = 2), 1.6 mg/L; 450 mg daily (n = 3), 1.24 mg/L; 600 mg daily (n = 2), 2 mg/L and 900 mg (n = 1) 5.3 mg/L. The Ro12-5637 metabolite was not detected and the Ro12-8095, was not quantified.[2] Using data in presented in the paper, the maximum amount of moclobemide that an infant would receive is estimated to be about 4% (range 2% to 6%) of the maternal weight-adjusted dosage. Average infant doses should be less than this.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Nine women were being treated for postpartum depression with moclobemide in daily dosages ranging from 150 mg to 900 mg. All breastfed (extent not stated) their infants during therapy, but the duration of infant exposure to moclobemide in breastmilk was not stated. Maternal reports of infant weight gain, milestones and behavioral effects as well as clinical observation by the authors indicted no adverse effects in the breastfed infants.[2]

Four women who took moclobemide in dosages of 300 mg to 1200 mg daily during pregnancy were followed up in the neonatal period and at 1 year postpartum. All women breastfed (extent not stated) their infants. One woman ceased breastfeeding at 2 months postpartum because of severe gastroesophageal reflux in the infant; two other mothers breastfed beyond 12 months. The duration of breastfeeding in the fourth infant was not sated. All infants achieved developmental milestones.[3]

### Effects on Lactation and Breastmilk

Moclobemide increases serum prolactin in males and has caused galactorrhea in women.[4-7] The prolactin level in a mother with established lactation may not affect her ability to breastfeed.

### References

1 Pons G, Schoerlin MP, Tam YK, et al. Moclobemide excretion in human breast milk. Br J Clin Pharmacol 1990;29:27-31.2297459
2 Buist A, Dennerstein L, Maguire KP, et al. Plasma and human milk concentrations of moclobemide in nursing mothers. Hum Psychopharmacol 1998;13:579-82. doi:10.1002/(SICI)1099-1077(1998120)13:8<579::AID-HUP45>3.0.CO;2-4
3 Taylor T, Kennedy D. Safety of moclobemide in pregnancy and lactation, four case reports. Birth Defects Res A Clin Mol Teratol 2008;82:413. doi:10.1002/bdra.20478
4 Koulu M, Scheinin M, Kaarttinen A, et al. Inhibition of monoamine oxidase by moclobemide: Effects on monoamine metabolism and secretion of anterior pituitary hormones and cortisol in healthy volunteers. Br J Clin Pharmacol 1989;27:243-55.2469451
5 Juruena MF, Pires ML, Calil HM. Moclobemide effects on prolactin plasma levels in healthy individuals: the hormonal increase induced by a single dose is maintained during a 4-week period of drug intake. Int Clin Psychopharmacol 1997;12:317-21.9547133
6 Scheinin M, Koulu M, Karhuvaara S, et al. Evidence that the reversible MAO-A inhibitor moclobemide increases prolactin secretion by a serotonergic mechanism in healthy male volunteers. Life Sci 1990;47:1491-9.2250565
7 Dunn NR, Freemantle SN, Pearce GL, et al. Galactorrhoea with moclobemide. Lancet 1998;351:802.9519955

## Substance Identification

### Substance Name

Moclobemide

### CAS Registry Number

71320-77-9

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antidepressive Agents

Monoamine Oxidase Inhibitors